# Dalfampridine

CASRN: 504-24-5

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of dalfampridine during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Dalfampridine

### CAS Registry Number

504-24-5

### Drug Class

- Breastfeeding
- Lactation
- Neuromuscular Agents
- Potassium Channel Blockers